# Creatine

CASRN: 57-00-1

## Drug Levels and Effects

### Summary of Use during Lactation

Creatine is used as a dietary supplement to increase muscle mass and improve exercise performance. Creatine is a normal component of human milk, supplying about 9% of the infant’s daily requirements, although the amount varies by country and ethnicity.[1,2] Creatine levels are highest in colostrum, with levels decreasing over the first 2 weeks postpartum before stabilizing.[3] Milk levels of creatine have not been measured after supplementation in humans. Creatine blood levels are lower in vegan than omnivorous mothers.[4] Some authors speculate that creatine supplementation of nursing mothers might help avoid creatine deficiency syndromes, but no studies are available that test this hypothesis.[5] Creatine is converted into creatinine in the mother's and infant's bodies. It can increase the infant's serum creatinine, which may alter estimations of the infant's kidney function.[6] Until more data are available, it is probably best to avoid creatine supplementation unless it is prescribed by a healthcare professional.

### Drug Levels

Creatine is a normal component of human milk. Milk levels of creatine have not been measured after exogenous administration in humans.

Maternal Levels. North American and European milk creatine values average about 10.5 mg/L with a range of 9 to 12 mg/L. This value translates into about 7 mg daily for intake via milk for exclusively breastfed infants, or 10% of an infant’s daily requirement for 0- to 6-month-old infants. Adequate daily intake of creatine for 7- to 12-month-old infants is estimated to be 8.4 mg. Creatine levels might be elevated in the Indian population, reaching 38 mg/L at 6 months of lactation in one study.[7]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Garwolińska D, Namiesnik J, Kot-Wasik A, et al. Chemistry of human breast milk-a comprehensive review of the composition and role of milk metabolites in child development. J Agric Food Chem 2018;66:11881–96.30247884
2 Gay MCL, Koleva PT, Slupsky CM, et al. Worldwide variation in human milk metabolome: Indicators of breast physiology and maternal lifestyle? Nutrients 2018;10:1151.30420587
3 Mihatsch WA, Stahl B, Braun U. The umbilical cord creatine flux and time course of human milk creatine across lactation. Nutrients 2024;16:345.38337631
4 Herrero Jiménez MP, Del Pozo de la Calle S, Cuadrado Vives C, et al. Nutritional supplementation in pregnant, lactating women and young children following a plant-based diet: A narrative review of the evidence. Nutrition 2025;136:112778.40373355
5 Wallimann T, Tokarska-Schlattner M, Schlattner U. The creatine kinase system and pleiotropic effects of creatine. Amino Acids 2011;40:1271–96.21448658
6 Hülsemann J, Manz F, Wember T, et al. Administration of creatine and creatinine with breast milk and infant milk preparations. Klin Padiatr 1987;199:292–5.3657037
7 Ostojic SM. Establishing reference intakes for creatine in infants aged 0 to 12 months. Nutr Rev 2025;83:e2139–e43.39271173

## Substance Identification

### Substance Name

Creatine

### CAS Registry Number

57-00-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Amino Acids

Complementary Therapies